# Brexanolone

CASRN: 516-54-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low amounts of brexanolone in milk and low oral bioavailability, brexanolone would not be expected to cause any adverse effects in breastfed infants. If brexanolone is required by the mother, it is not a reason to discontinue breastfeeding. Because excessive sedation or sudden loss of consciousness can occur during brexanolone infusion, it is suggested that patients provide a separate caregiver for any child who is present during the infusion.[1]

### Drug Levels

Brexanolone is the pharmaceutical name for the naturally occurring hormone allopregnanolone. Brexanolone has an oral bioavailability of less than 5% in adults.

Maternal Levels. Twelve healthy women who were less than 6 months postpartum received an intravenous infusion of brexanolone titrated to a maximum of 90 mg/kg per hour then tapered down over 60 hours at various study sites. Breastmilk was collected at random times, but at least every 12 hours, daily for 7 days. Peak milk levels occurred between hours 24 and 48 of the infusion when the maximum dosage was being infused. The average peak allopregnanolone breastmilk level was 125 mcg/L. Milk levels fell below the limit of detection (5 mcg/L) in most women by about 3 days after the end of the infusion. These data were incorporated into a population pharmacokinetic model that predicted that 95% of patients have milk allopregnanolone levels <10 mcg/L at 36 hours after the end of the infusion. The predicted median weight-adjusted percent of maternal dosage was 0.69% and the maximum was 1.3%.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In a study of 12 healthy women given a 60-hour infusion of brexanolone, there were no reports of effects on milk production according to the manufacturer.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline, Zuranolone

### References

1 Rosen-Carole C, Ito S. Using brexanolone for postpartum depression must account for lactation. Matern Child Health J 2021;25:1007-9.34019187
2 Wald J, Henningsson A, Hanze E, et al. Allopregnanolone concentrations in breast milk and plasma from healthy volunteers receiving brexanolone injection, with population pharmacokinetic modeling of potential relative infant dose. Clin Pharmacokinet 2022;61:1307-19.35869362

## Substance Identification

### Substance Name

Brexanolone

### CAS Registry Number

516-54-1

### Drug Class

Breastfeeding

Lactation

Milk, Human

Antidepressants

Antidepressive Agents

GABA Agents

Hormones

Progesterone Congeners